# Ciguatera Poisoning

## Drug Levels and Effects

### Summary of Use during Lactation

Ciguatera toxin is created in tropical reef-dwelling fish that ingest toxins from algal blooms produced by the dinoflagellate Gambierdiscus toxicus. The main toxin appears to be ciguatoxin, although maitotoxin has also been implicated. Ciguatera can present initially with gastrointestinal or neurological symptoms, such as paresthesia of the extremities and around the mouth. Although the fatality rate is low, neurologic effects can last for weeks. Mothers suspected of having ciguatera poisoning should not breastfeed until they have recovered.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A review of 12,890 cases in French Polynesia from 1964 to 1986 found 3 breastfed infants between 6 and 10 months of age who were affected following maternal poisoning.[1]

Another case of a breastfed infant under 3 months of age was reported in 1989 from Hawaii, in which green stools were the primary symptom. Breastfeeding was discontinued with improvement. Symptoms reappeared when breastfeeding was resumed a few days later.[2] Because of the time between exposures, it is unclear if ciguatera toxin was the offending agent.

A 4-month old who was breastfed 1 and 4 hours after maternal ingestion of a kingfish occurred in the Bahamas. Symptoms included colic, and diarrhea persisting for 48 hours beginning about 10 hours after the first nursing. This was followed by fine maculopapular rash and fussiness that lasted for 2 weeks.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Bagnis RA, Legrand AM. Clinical features on 12,890 cases of ciguatera (fish poisoning) in French Polynesia. In, Gopalakrishnakone P, Tan CK, eds Progress in venom and toxin research: Proceedings of the First Asia-Pacific Congress on Animal, Plant, and Microbial Toxins Singapore June 24-27, 1987:372-84.
2 Anon. Letter to the editor. Vet Hum Toxicol 1989;31:71.2711614
3 Blythe DG, de Sylva DP. Mother's milk turns toxic following fish feast. JAMA 1990;264:2074.2214071

## Substance Identification

### Substance Name

Ciguatera Poisoning

### Drug Class

Breast Feeding

Lactation

Milk, Human

Foodborne Diseases

Poisoning